# Polythiazide

CASRN: 346-18-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the amount of polythiazide in breastmilk. Intense diuresis with large doses may decrease breastmilk production. Other diuretics in low doses are preferred over polythiazide.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Polythiazide 2 mg was given twice daily for 8 days beginning within 24 hours of delivery to suppress postpartum lactation. Patients also had breast binding for at least 10 days and fluid restriction. The authors reported that this technique was effective in 124 cases reviewed.[1] There are no data on the effects of diuretics on established lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Timmermans HL. Use of P 2525 or polythiazide as suppressor of lactation during post-partum. Brux Med 1963;43:1051-6 14095820

## Substance Identification

### Substance Name

Polythiazide

### CAS Registry Number

346-18-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics